# Azelaic Acid

CASRN: 123-99-9

## Drug Levels and Effects

### Summary of Use during Lactation

Topical azelaic acid has not been studied during breastfeeding. Because only 4% of a dose is absorbed after topical application and it is a chemical that appears in foods, bloodstream, and breastmilk normally, azelaic acid is considered a low risk to the nursing infant.[1,2] If azelaic acid is required by the mother, it is not a reason to discontinue breastfeeding. Do not apply azelaic acid to the breast or nipple and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Acne) Benzoyl Peroxide, Clindamycin, Erythromycin, Tretinoin; (Rosacea) Metronidazole

### References

1 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651–68.38280680
2 Lyons CE, Smith AD., Schwartzman G., et al. Managing skin diseases that flare during pregnancy and in the postpartum period: Part 2- Management & safety considerations. J Am Acad Dermatol 2026 41692217
3 Noti A, Grob K, Biedermann M, et al. Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317–25.14623482

## Substance Identification

### Substance Name

Azelaic Acid

### CAS Registry Number

123-99-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Dermatologic Agents